# Bivalirudin

CASRN: 128270-60-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of bivalirudin during breastfeeding. Because the drug is absorbed orally, an alternate drug is preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

## Substance Identification

### Substance Name

Bivalirudin

### CAS Registry Number

128270-60-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Antithrombins